# Linaclotide

CASRN: 851199-59-2

## Drug Levels and Effects

### Summary of Use during Lactation

Linaclotide is minimally absorbed from the gastrointestinal tract and the drug and its active metabolite are not measurable in milk following administration of doses up to 290 mcg daily. Linaclotide appears to be acceptable in nursing mothers and no special precautions are required.

### Drug Levels

Linaclotide is metabolized in the gastrointestinal tract to its active metabolite, MM-419447.

Maternal Levels. In a multicenter study, 7 lactating women were taking linaclotide in doses of 72 mcg (n = 5), 145 mcg (n = 1) or 290 mcg (n = 1) once daily. Milk was pumped on day 1 and day 3 of the study. Over 24-hours of milk collection on day 3, concentrations of linaclotide and MM-419447 in milk samples were below the quantitation limits (<0.25 mcg/L and <1 mcg/L, respectively) at all time points in all participants.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Irritable Bowel Syndrome) Lubiprostone, Plecanatide, Polyethylene Glycol, Psyllium, Tenapanor

### References

1 Crittenden N, McGeeney D, Assouline-Dayan Y, et al. Linaclotide is not detectable in breast milk of lactating women: An open-label, phase 1 study. J Can Assoc Gastroenterol 2021;4 (Suppl 1):A236. doi:10.1093/jcag/gwab002.234

## Substance Identification

### Substance Name

Linaclotide

### CAS Registry Number

851199-59-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Agents

Peptides

Guanylate Cyclase C Agonists

Laxatives